# Methylnaltrexone

CASRN: 83387-25-1

## Drug Levels and Effects

### Summary of Use during Lactation

Methylnaltrexone is not marketed in the United States, but is available in other countries. No information is available on the use of methylnaltrexone during breastfeeding. The manufacturer recommends avoiding breastfeeding in mothers taking methylnaltrexone. Based on pharmacokinetic data, the oral absorption of methylnaltrexone appears to be very low. Observe breastfed infants who have been exposed to opioids during pregnancy or postpartum for signs of opioid withdrawal, especially diarrhea.

### Drug Levels

Based on the serum AUC values of oral and subcutaneous methylnaltrexone in the product labeling, it appears that methylnaltrexone has an oral bioavailability of <5%.

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Naldemedine

## Substance Identification

### Substance Name

Methylnaltrexone

### CAS Registry Number

83387-25-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Narcotic Antagonists